# Magnesium Sulfate

CASRN: 7487-88-9

## Drug Levels and Effects

### Summary of Use during Lactation

Intravenous magnesium increases milk magnesium concentrations only slightly and oral absorption of magnesium by the infant is poor, so maternal magnesium therapy is not expected to affect the breastfed infant's serum magnesium. Although intravenous magnesium sulfate given prior to delivery might affect the infant's ability to breastfeed, postpartum use of intravenous magnesium sulfate for 24 hours appears to delay the onset of lactation compared to shorter durations of 6 to 12 hours.[1,2] Intention to breastfeed may be an important determinant of breastfeeding initiation.[3] One group of experts recommends reserving postpartum magnesium sulfate prophylaxis for those women with persistent neurologic symptoms within 7 days of birth.[4]

### Drug Levels

Maternal Levels. Ten women with pre-eclampsia were given 4 grams of magnesium sulfate intravenously followed by 1 gram per hour until 24 hours after delivery. While the average serum magnesium was 35.5 mg/L in treated women compared to 18.2 mg/L in 5 untreated controls, colostrum magnesium levels at the time of discontinuation of the infusion was 64 mg/L in treated women and 48 mg/L in the controls. By 48 hours after discontinuation, colostrum magnesium levels were only slightly above control values and by 72 hours they were virtually identical to controls.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

One mother who received intravenous magnesium sulfate for 3 days for pregnancy-induced hypertension had lactogenesis II delayed until day 10 postpartum. No other specific cause was found for the delay, although a complete work-up was not done.[6] A subsequent controlled clinical trial found no evidence of delayed lactation in mothers who received intravenous magnesium sulfate therapy.[7] Another study found that among women with severe pre-eclampsia who received intravenous magnesium sulfate for up to one day postpartum and who intended to breastfeed, 85% of infants receiving routine well-baby care and 69% of those admitted to the NICU, breastfeeding was successfully initiated.[3]

A study randomized women with preeclampsia to receive intravenous magnesium sulfate for either 6 or 24 hours postpartum. There was no difference in the rate of eclampsia between the two groups. However, those who received the infusion for 24 hours had a delayed onset of lactation, 36.5 hours compared with 25.7 hours in the 6-hour group.[8]

A prospective, multicenter, randomized, controlled trial in 9 Latin American maternity hospitals compared patients with severe pre-eclampsia who had received at least 8 grams of magnesium sulfate prior to placebo. Patients were randomized to continue magnesium sulfate for 24 hours postpartum (n = 555) or stopping the infusion (n = 558). The time to lactation was significantly delayed in those who received magnesium sulfate postpartum (24.1 vs. 17.1 hours).[9]

A study randomized pregnant women with moderate to severe pre-eclampsia to receive magnesium sulfate intravenously infused at the same dose (not specified) for 8 or 24 hours. In patients who received the 8-hour infusion, the mean time to initiate breastfeeding was 14.6 hours compared to 24.3 hours in the patients who received the 24-hour infusion, which was a statistically significant difference.[10]

A retrospective chart review of mothers who delivered at the University of Chicago found that intravenous magnesium sulfate during delivery was associated with over 60% reduced odds of breastfeeding initiation compared to mothers who received no magnesium.[11]

### Alternate Drugs to Consider

(Laxative) Docusate, Magnesium Hydroxide, Psyllium, Sodium Picosulfate, Sodium Phosphate

### References

1 Quist-Nelson J, de Ruigh A, Lemoine ER, et al. Early magnesium discontinuation postpartum and eclampsia risk: A systematic review and meta-analysis. Pregnancy Hypertens 2024;37:101141.39018830
2 Solly HH, Clark RRS, Spatz DL. The effect of magnesium sulfate in the treatment of maternal postpartum hypertension on breastfeeding: An integrative review. Breastfeed Med 2026;21:171–85.41572820
3 Cordero L, Valentine CJ, Samuels P, et al. Breastfeeding in women with severe preeclampsia. Breastfeed Med 2012;7:457–63.22871169
4 Cagino K, Prabhu M, Sibai B. Is magnesium sulfate theralpy warranted in all cases of late postpartum severe hypertension? A suggested approach to a clinical conundrum. Am J Obstet Gynecol 2023;229:641–6.37467840
5 Cruikshank DP, Varner MW, Pitkin RM. Breast milk magnesium and calcium concentrations following magnesium sulfate treatment. Am J Obstet Gynecol 1982;143:685–8.7091241
6 Haldeman W. Can magnesium sulfate therapy impact lactogenesis? J Hum Lact 1993;9:249–52.8260059
7 Riaz M, Porat R, Brodsky NL, et al. The effects of maternal magnesium sulfate treatment on newborns: A prospective controlled study. J Perinatol 1998;18:449–54.9848759
8 Vigil-DeGracia P, Ramírez R, Duran Y, et al. Magnesium sulfate for 6 vs 24 hours post delivery in patients who received magnesium sulfate for less than 8 hours before birth: A randomized clinical trial. BMC Pregnancy Childbirth 2017;17:241.28738788
9 Vigil-DeGracia P, Ludmir J, Ng J, et al. Is there benefit to continue magnesium sulfate post-partum in women receiving magnesium sulfate prior to delivery? A randomized controlled study. BJOG 2018;125:1304–11.29878650
10 Mushtaq S, Zafar M, Ahmed A, et al. Eight hours versus twenty four hours postpartum magnesium sulphate for prophylaxis in women with pre-eclampsia. Pakistan Journal of Medical and Health Sciences 2023;17:182–5. doi:10.53350/pjmhs2023174182
11 Kuriloff MA, Keenan-Devlin L, Betancourt GB, et al. Perinatal magnesium sulfate and human milk feeding initiation during postnatal hospitalization. Breastfeed Med 2023;18:A16. doi:10.1089/bfm.2023.29253.abstracts

## Substance Identification

### Substance Name

Magnesium Sulfate

### CAS Registry Number

7487-88-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiarrhythmics

Anticonvulsants

Cathartics

Gastrointestinal Agents

Magnesium Compounds

Minerals

Tocolytic Agents